# Ambroxol

CASRN: 18683-91-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ambroxol is not approved for marketing in the United States by the U.S. Food and Drug Administration but is available in other countries. No information is available on the use of ambroxol during breastfeeding. Because it is about 90% protein bound, the amounts in milk are likely to be low. If a mother requires ambroxol, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Dextromethorphan

## Substance Identification

### Substance Name

Ambroxol

### CAS Registry Number

18683-91-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antitussive Agents